# Perindopril

CASRN: 82834-16-0

## Drug Levels and Effects

### Summary of Use during Lactation

Limited information indicates that only low levels of perindopril and its active metabolite are found in breastmilk, which is consistent with other drugs in this class. Amounts ingested by the infant are small and would not be expected to cause any adverse effects in breastfed infants.

### Drug Levels

Maternal Levels. A breast feeding mother who was taking perindopril erbumine 10 mg twice daily for 2 weeks donated one breastmilk sample 9 hours after a dose. The sample contained 0.9 mcg/L of perindopril and 22.5 mcg/L of perindoprilat in breastmilk.[1]

Ten women taking perindopril donated a total of 79 milk samples. The exact timing of samples was not given. Dosages ranged from 5 to 20 mg daily. In the women taking 5 mg daily (n = 3), the average milk perindopril concentration was 0.32 mcg/L. In the women taking 10 mg daily (n = 6), the average milk perindopril concentration was 0.57 mcg/L. In the woman taking 20 mg daily (n = 1), the average milk perindopril concentration was 1.03 mcg/L. For the metabolite, perindoprilat, the 5 mg dose yielded an average milk concentration of 10.35 mcg/L, the 10 mg dose yielded an average of 9.25 mcg/L, and the 20 mg dose 0.42 mcg/L. The weight-adjusted infant dosage ranges were 0.0005 to 0.2% for perindopril and 0.03 to 4.6% for perindoprilat.[2]

Infant Levels. Three infants were breastfed (extent not stated) by mothers taking perindopril. One infant whose mother was taking 5 mg daily had serum levels of 1.12 mcg/L of perindopril and 10.14 mcg/L of perindoprilat. In two infants whose mothers were taking 10 mg daily, average perindopril level was 0.78 mcg/L and perindoprilat was 2.64 mcg/L.[2]

### Effects in Breastfed Infants

Ten infants were breastfed (extent not stated) by mothers were taking perindopril 5 to 20 mg daily. All infants grew and developed normally according to their parents.[2]

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

Candesartan, Benazepril, Captopril, Enalapril, Lisinopril, Quinapril, Valsartan

### References

1 Lwin EMP, Gerber C, Song Y, et al. A new LC-MS/MS bioanalytical method for perindopril and perindoprilat in human plasma and milk. Anal Bioanal Chem 2017;409:6141–8.28842738
2 Leggett C, Lwin EMP, Ritchie U, et al. Perindopril in breast milk and determination of breastfed infant exposure: A prospective observational study. Drug Des Devel Ther 2020;14:961-7.32184565

## Substance Identification

### Substance Name

Perindopril

### CAS Registry Number

82834-16-0

### Drug Class

Breast Feeding

Lactation

Milk, Human

Antihypertensive Agents

Angiotensin-Converting Enzyme Inhibitors

ACE Inhibitors